# Ensitrelvir

CASRN: 2647530-73-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of ensitrelvir during breastfeeding. Because ensitrelvir is about 98% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during ensitrelvir therapy and for at least 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ensitrelvir

### CAS Registry Number

2647530-73-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents